# Eplontersen

CASRN: 1637600-16-8

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of eplontersen during breastfeeding. Because eplontersen has a molecular weight of 9046 Da and is over 98% bound to plasma proteins, the amounts in milk are likely to be very low. It is also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal. But its half-life is long, so it could accumulate in the infant. If a mother requires eplontersen, it is not a reason to discontinue breastfeeding. Until more data become available, eplontersen should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant. Monitor the breastfed infant for vomiting and possible vitamin A deficiency.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Eplontersen

### CAS Registry Number

1637600-16-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Oligonucleotides